# Albuterol

CASRN: 18559-94-9

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of albuterol by mouth or inhaler during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1-3] The authors of several reviews and expert guidelines agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[4-7]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Terbutaline

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91.6586490
2 Boréus LO, de Château P, Lindberg C, et al. Terbutaline in breast milk. Br J Clin Pharmacol 1982;13:731-2.7082542
3 Lönnerholm G, Lindström B. Terbutaline excretion into breast milk. Br J Clin Pharmacol 1982;13:729-30.7082541
4 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
5 Taddio A, Ito S. Drugs and breast-feeding. In: Koren G, ed. Maternal-fetal toxicology A clinician's guide 3rd ed. New York: Marcel Dekker; 2001.177-32.
6 NAEPP expert panel report. Managing asthma during pregnancy: Recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545
7 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62.38513758

## Substance Identification

### Substance Name

Albuterol

### CAS Registry Number

18559-94-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents

Beta Adrenergic Agonists